# Ibuprofen

CASRN: 15687-27-1

## Drug Levels and Effects

### Summary of Use during Lactation

Because of its extremely low levels in breastmilk, short half-life and safe use in infants in doses that are much higher than those excreted in breastmilk, ibuprofen is a preferred choice as an analgesic or anti-inflammatory agent in nursing mothers. Giving ibuprofen and acetaminophen on a fixed schedule for 24 hours after vaginal delivery appears to increase the breastfeeding rate. There is no difference in breastfeeding initiation rate between ibuprofen or acetaminophen alone after vaginal delivery.

### Drug Levels

Maternal Levels. Two early studies attempted measurement of ibuprofen in milk. In one, the patient’s dose was 400 mg twice daily, while in the second study of 12 patients, the dose was 400 mg every 6 hours. Ibuprofen was undetectable in breastmilk in both studies (<0.5 and 1 mg/L, respectively).[1,2]

A later study using a more sensitive assay found ibuprofen in the breastmilk of one woman who took 6 doses of 400 mg orally over 42.5 hours. A milk ibuprofen level of 13 mcg/L was detected 30 minutes after the first dose. The highest level measured was 180 mcg/L about 4 hours after the third dose, 20.5 hours after the first dose. The authors estimated that the infant would receive about 17 mcg/kg daily (100 mcg daily) with the maternal dose of approximately 1.2 grams daily. This dose represents 0.0008% of the maternal weight-adjusted dosage[3] and 0.06% of the commonly accepted infant dose of 30 mg/kg daily (10 mg/kg every 8 hours).

Single milk samples were taken from 13 women between 1.5 and 8 hours after the third dose of ibuprofen in a daily dosage regimen averaging 1012 mg daily (range 400 to 1200 mg daily). Of the 13 milk samples analyzed, the mean milk concentration was 361 mcg/L (range 164 to 590 mcg/L). The mean weight-adjusted percentage of the maternal dosage (relative infant dosage [RID]) was estimated to be <0.38%; however, the RID varied with the time postpartum and the milk protein content. The RID was highest in the colostral phase when the milk protein content was the highest (RID 0.6%). The estimated mean dosage for a fully breastfed infants was 68 mcg/kg daily or 0.2% of a pediatric dosage.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

At least 23 cases are reported in the literature in which infants (ages not stated) were breastfed during maternal ibuprofen use with no adverse effects reported.[1,3,5]

### Effects on Lactation and Breastmilk

A randomized study compared the use of ibuprofen 400 mg plus acetaminophen 1 gram every 6 hours for 24 hours to the same combination on demand after normal vaginal delivery. Women who received the analgesics on a fixed schedule were more likely to breastfeed their baby (98% vs 88%) than those receiving analgesics on demand, even though their average pain scores were not different.[6]

A double-blind study compared acetaminophen 1000 mg to ibuprofen for pain control after vaginal delivery. No difference was seen between the two treatments in the percentage of mothers who initiated breastfeeding of their infants.[7]

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Weibert RT, Townsend RJ, Kaiser DG, . Lack of ibuprofen secretion into human milk. Clin Pharm 1982;1:457–8.7184678
2 Townsend RJ, Benedetti TJ, Erickson SH, . Excretion of ibuprofen into breast milk. Am J Obstet Gynecol 1984;149:184–6.6720796
3 Walter K, Dilger C. Ibuprofen in human milk. Br J Clin Pharmacol 1997;44:211–2.9278216
4 Rigourd V, de Villepin B, Amirouche A, . Ibuprofen concentrations in human mature milk--first data about pharmacokinetics study in breast milk with AOR-10127 “Antalait” study. Ther Drug Monit 2014;36:590–6.24695355
5 Ito S, Blajchman A, Stephenson M, . Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418
6 Bachar G, Alter A, Justman N, . Fixed-time interval vs on-demand oral analgesia after vaginal delivery: A randomized controlled trial. Am J Obstet Gynecol MFM 2024;6:101372.38583715
7 Ram S, Madar D, Ram HS, . Paracetamol versus ibuprofen for early postpartum pain control: A randomized controlled trial. Arch Gynecol Obstet 2025;12:51–7.

## Substance Identification

### Substance Name

Ibuprofen

### CAS Registry Number

15687-27-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal